# Sirolimus

CASRN: 53123-88-9

## Drug Levels and Effects

### Summary of Use during Lactation

Information from one mother indicates that the amount of sirolimus in milk is very low. Additionally, the oral bioavailability of the drug is poor, so systemic exposure in the infant is likely very low. A few infants have reportedly been breastfed during maternal sirolimus therapy. Until more data become available, sirolimus should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

Sirolimus is undetectable in the bloodstream after application to the skin, so use of topical sirolimus is unlikely to affect a nursing infant. Avoid application to the nipple area and ensure that the infant’s skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. A woman taking sirolimus for tuberous sclerosis in a dose of 4 mg daily donated a total of 18 milk samples on days 10, 11 and 15 postpartum, although she was not breastfeeding her infant. Milk concentrations ranged from 173 to 492 ng/L, with the highest value 1 hour after the dose.[1] Using the highest level measured, the worst-case RID value would be 0.1%.

Infant Levels. One breastfed infant whose mother was taking sirolimus for lymphangioleiomyomatosis in an unspecified dosage had an undetectable amount of blood sirolimus.[2]

### Effects in Breastfed Infants

One infant was reported breastfed (extent not stated) during maternal therapy with sirolimus, tacrolimus and prednisone in unspecified dosages following a kidney-pancreas transplant. The authors who followed the mother knew of no serious side effects in the infant.[3]

A review of the Transplant Pregnancy Registry International database from 1999 to 2024 found that 4 mothers with transplants had breastfed their infants for at least 4 weeks while taking sirolimus.[4]

Seven women with breastfed their infants (extent not stated) while using sirolimus for treatment of lymphangioleiomyomatosis. At a median age of 3.5 years (range 1 to 6.5 years) no adverse health outcomes had been reported.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azathioprine, Cyclosporine, Tacrolimus

### References

1 Nogueira E, Bento da Silva A, Rebelo M, . Sirolimus excretion in breast milk: A preliminary investigation. Front Pharmacol 2026;17:1859156.42434132
2 Krishna R, Johnson SR, Ataya A, . Sirolimus use during pregnancy in women with lymphangioleiomyomatosis. Annals of the American Thoracic Society 2025;22:1794-7. 2325-6621 2329-6933 40587229
3 Bramham K, Chusney G, Lee J, . Breastfeeding and tacrolimus: Serial monitoring in breast-fed and bottle-fed infants. Clin J Am Soc Nephrol 2013;8:563-7.23349333
4 Coscia LA, Kliniewski D, Rao S, . Breastfeeding after transplantation: 25 year review (1999-2024). Am J Transplant 2025;25:S772. doi:10.1016/j.ajt.2025.07.1820

## Substance Identification

### Substance Name

Sirolimus

### CAS Registry Number

53123-88-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents